# Iopamidol

CASRN: 60166-93-0

## Drug Levels and Effects

### Summary of Use during Lactation

Intravenous iodinated contrast media are poorly excreted into breastmilk and poorly absorbed orally so they are not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. Guidelines developed by several professional organizations state that breastfeeding need not be disrupted after a nursing mother receives an iodine-containing contrast medium.[1-4] However, because there is no published experience with iopamidol during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Diatrizoate, Iohexol

### References

1 Webb JA, Thomsen HS, Morcos SK, et al. (2005). The use of iodinated and gadolinium contrast media during pregnancy and lactation. Eur Radiol.
2 Chen MM, Coakley FV, Kaimal A, et al. (2008). Guidelines for computed tomography and magnetic resonance imaging use during pregnancy and lactation. Obstet Gynecol.
3 Copel J, El-Sayed Y, Heine RP, et al. (2017). Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol.
4 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2022;Version 2022:106-7. https://www.acr.org/Clinical-Resources/Contrast-Manual

## Substance Identification

### Substance Name

Iopamidol

### CAS Registry Number

60166-93-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents